# Chlorella

## Drug Levels and Effects

### Summary of Use during Lactation

Chlorella sp. is a fresh-water green alga that contains various nutrients such as carotenes, protein, fiber, vitamins, minerals and chlorophyll. Taking Chlorella supplements during pregnancy may decrease dioxin content and increase the concentration of some carotenes and immunoglobulin A in breastmilk. Chlorella is usually well tolerated, but can cause nausea, diarrhea, abdominal cramping, flatulence, and green stools. Allergic reactions, including asthma and anaphylaxis, have been reported in people taking Chlorella, and in those preparing chlorella tablets. Photosensitivity reactions have also occurred following ingestion of Chlorella. The high vitamin K content of Chlorella may decrease warfarin effectiveness. Maternal Chlorella intake would not be expected to cause adverse effects in most breastfed infants and is probably acceptable during breastfeeding. Green breastmilk discoloration has been reported.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Studies in Japan found that supplementation with Chlorella pyrenoidosa (Sun Chlorella A tablets, Sun Chlorella Corp., Kyoto, Japan) during pregnancy decreased the amount of dioxins and increased the concentration of immunoglobulin A in breastmilk.[1,2]

Ten healthy women took 2 grams of dried Chlorella powder in a tablet formulation (Biorinck, Chlorella Industry Co. Ltd.) after each of 3 main meals of the day, beginning at 16 to 20 weeks of pregnancy and continuing until delivery. Tablets contained lutein 270 mg, beta-carotene 90 mg, zeaxanthin 30 mg, alpha-carotene 7 mg, vitamin K1 (phylloquinone, phytonadione) 3 mg, and chlorophylls 3.2 grams per 100 grams, in addition to numerous vitamins and minerals. Compared to 10 pregnant women who took no Chlorella, the breastmilk of the treated women contained significantly more beta-carotene (1.7-fold higher) and lutein (2.7-fold higher), zeaxanthin (2.6-fold higher) in the first 6 days postpartum. No differences were found in the breastmilk content of beta-cryptoxanthin, alpha-carotene, or lycopene between groups.[3]

Three days before delivery, a mother replaced her normal iron supplement with blue-green algae complex (blue-green algae, Chlorella, and spirulina; Ambrosia-SupHerb Ltd., Israel) 750 mg once daily. On the second day after delivery she expressed 30 mL of dark green milk. No abnormal milk cytology was found and a microbiologic culture was negative. After stopping the supplement, her milk returned to a normal color over the next 3 days. The change in color was probably caused by the algae supplement.[4]

### References

1 Nakano S, Noguchi T, Takekoshi H, et al. (2005). Maternal-fetal distribution and transfer of dioxins in pregnant women in Japan, and attempts to reduce maternal transfer with Chlorella (Chlorella pyrenoidosa) supplements. Chemosphere.
2 Nakano S, Takekoshi H, Nakano M. (2007). Chlorella (Chlorella pyrenoidosa) supplementation decreases dioxin and increases immunoglobulin A concentrations in breast milk. J Med Food.
3 Nagayama J, Noda K, Uchikawa T, et al. (2014). Effect of maternal Chlorella supplementation on carotenoid concentration in breast milk at early lactation. Int J Food Sci Nutr.
4 Naor N, Fridman E, Kouadio F, et al. (2019). Green breast milk following ingestion of blue-green algae: A case report. Breastfeed Med.

## Substance Identification

### Substance Name

Chlorella

### Scientific Name

Chlorella sp.

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal